# Apremilast

CASRN: 608141-41-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of apremilast during breastfeeding. Although it is not contraindicated, international guidelines and reviews recommend avoiding apremilast during breastfeeding.[1-5] An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Etanercept, Gold Sodium Thiomalate, Hydroxychloroquine, Infliximab, Methotrexate, Penicillamine, Sulfasalazine

### References

1 Rademaker M, Agnew K, Andrews M, et al. Psoriasis in those planning a family, pregnant or breast-feeding. The Australasian Psoriasis Collaboration. Australas J Dermatol 2018;59:86–100.28543445
2 Puchner A, Grochenig HP, Sautner J, et al. Immunosuppressives and biologics during pregnancy and lactation: A consensus report issued by the Austrian Societies of Gastroenterology and Hepatology and Rheumatology and Rehabilitation. Wien Klin Wochenschr 2019;131:29–44.30643992
3 Belinchón I, Velasco M, Ara-Martín M, et al. Management of psoriasis during preconception, pregnancy, postpartum, and breastfeeding: A consensus statement. Actas Dermosifiliogr (Engl Ed) 2021;112:225–41.33065101
4 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651–68.38280680
5 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025.40287311

## Substance Identification

### Substance Name

Apremilast

### CAS Registry Number

608141-41-9

### Drug Class

Breastfeeding

Lactation

Milk, Human

Analgesics

Antirheumatic Agents

Enzyme Inhibitors

Phosphodiesterase Inhibitors